# Eliglustat

CASRN: 491833-29-5

## Drug Levels and Effects

### Summary of Use during Lactation

No published experience exists with miglustat during breastfeeding. Because of the lack of information and its side effect profile, most sources, including the manufacturer, consider breastfeeding to be contraindicated during maternal eliglustat therapy.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Alglucerase, Imiglucerase, Taliglucerase Alfa

### References

1 Calderón E, Rodríguez-Fernández A, Calderón-Baturone I, . Spanish consensus on managing pregnancy in women with Gaucher disease. Orphanet J Rare Dis 2025;20:146.40155919
2 Balwani M, Burrow T, Charrow J, . Recommendations for the use of eliglustat in the treatment of adults with Gaucher disease type 1 in the United States. Mol Genet Metab 2016;117:95–103.26387627

## Substance Identification

### Substance Name

Eliglustat

### CAS Registry Number

491833-29-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Glycoside Hydrolase Inhibitors